# Monkeypox Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

Worldwide, three vaccines are available for monkeypox (Mpox), known as MVA-BN, ACAM-2000 and LC16. Only MVA-BN (Jynneos) and ACAM-2000 are available in the United States. The MVA-BN vaccine does not replicate and behaves like a non-live vaccine. ACAM-2000 vaccine is live and is contraindicated in breastfeeding. No information is available on the LC16 (minimally replicating) vaccine during breastfeeding, so it should probably be avoided until more information is available.[1] The US Centers for Disease Control and Prevention and the World Health Organization state that if the MVA-BN vaccine can be offered to breastfeeding women who are otherwise eligible and breastfeeding need not be discontinued after vaccination. The risks and benefits of the vaccine should be discussed with the patient using shared decision-making.[2-4]

Individuals with Mpox disease should feed their infants with pasteurized donor milk or infant formula until all of their lesions are healed. Numerous other safety precautions are advised for mothers with Mpox.

### Drug Levels

Maternal Levels. Milk samples were collected from a nursing mother the day before and at 2, 6, 20, 36, and 72 hours and 7 and 14 days and 10 weeks after receiving the first dose of intradermal smallpox and monkeypox vaccine, live, nonreplicating (Jynneos, Bavarian Nordic). A second dose was given at 12 weeks and milk samples were taken at 3 hours, 3 days, and 2 and 12 weeks after the dose. Milk IgA against 3 vaccine antigens increased 0.9- to 2.2-fold 2 weeks after dose 2, reaching a peak titer increase of 1.1- to 2.7-fold at 12 weeks after dose 2. Secretory antibody levels increased to 1.1- to 2-fold at 2 weeks after dose 2 and reached a peak of 2- to 3.2-fold increase at the 12-week time point. IgA and secretory antibody responses in milk were correlated, suggesting most milk IgA was secretory IgA. No vaccine protein or DNA components were detected in the milk samples.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Imran M, Sohail M, Kamran J, et al. Vaccines and antiviral therapies for Mpox virus in pregnant and breastfeeding women: Efficacy and maternal-child outcomes. Viruses 2025;17:456.40284899
2 Centers for Disease Control and Prevention. Mpox clinical care and treatment during pregnancy. January 30, 2025https://www.cdc.gov/mpox/hcp/clinical-care/pregnancy.html
3 World Health Organization. Smallpox and mpox (orthopoxviruses): WHO position paper, August 2024. WHO Weekly Epidemiological Record 2024;99:429–56. https://www.who.int/publications/i/item/who-wer-9934-429-456
4 Hombach J., Lewis R., Holten J. V., et al. Breastfeeding mothers in DR Congo should have access to the mpox vaccine. Lancet Glob Health 2024;12:e1932.39577965
5 Yang X, Fox A, DeCarlo C, et al. Unique kinetics of the human milk antibody response to JYNNEOS vaccine for prevention of monkey pox: A case study. Breastfeed Med 2024;19:974–9.39360771

## Substance Identification

### Substance Name

Monkeypox Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines